# Sebelipase Alfa

CASRN: 1276027-63-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of sebelipase alfa during breastfeeding. Because it is a large protein molecule with a molecular weight of about 55,000 Da, the amount in milk is likely to be very low and absorption is unlikely because it is probably destroyed in the infant's gastrointestinal tract. If sebelipase alfa is required by the mother, it is not a reason to discontinue breastfeeding. Until more data are available, sebelipase alfa should be used with infant careful monitoring during breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Sebelipase Alfa

### CAS Registry Number

1276027-63-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzymes

Sterol Esterase